# Varicella Zoster Immune Globulin (Human)

CASRN: 445026-73-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of varicella zoster immune globulin during breastfeeding. Varicella zoster immune globulin is an immune globulin (IgG) rich in IgG antibodies against varicella zoster virus. IgG is a normal component of breastmilk that is likely to be partially destroyed in the infant's gastrointestinal tract and poorly absorbed by the infant during breastfeeding. Varicella zoster virus immune globulin can be given intramuscularly to infants weighing less than 2 kg. No special precautions are required during breastfeeding.

### Drug Levels

Maternal Levels. Colostrum (3 days postpartum) and milk (7 days postpartum) samples from 2 mothers who were receiving intravenous immunoglobulin (IVIG) for the treatment of common variable immunodeficiency were studied. One mother was receiving 400 to 500 mg/kg of IVIG monthly and the other received 600 to 700 mg/kg of IVIG monthly. The time of the last dose before sample collection was not reported. Immune globulin G (IgG) concentrations were normal in the first mother's colostrum and milk and higher than normal in the colostrum of the second mother. IgM levels were normal in the colostrum and milk first mother and low in the second.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Palmeira P, Costa-Carvalho BT, Arslanian C, et al. (2009). Transfer of antibodies across the placenta and in breast milk from mothers on intravenous immunoglobulin. Pediatr Allergy Immunol.

## Substance Identification

### Substance Name

Anthrax Immune Globulin Intravenous (Human)

### CAS Registry Number

445026-73-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Immunoglobulin G

Immunoglobulins